# Sodium Fluoride F 18

CASRN: 22554-99-0

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of sodium fluoride F 18 as a diagnostic agent. The manufacturer recommends withholding breastfeeding for 24 hours after a diagnostic dose of 300-450 MBq (8 to 12 mCi); however, this time might be longer than necessary given the minimal amount of fluoride that appears in breastmilk. Twenty-four hours is about 10 half-lives of fluoride F 18 and less than 0.01% of the radioactivity administered will remain in the body. The mother can nurse just before administration of the radiopharmaceutical. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[1,2]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at background levels, they may safely resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[3]

### Drug Levels

F18 is a positron emitter with a principal decay energy of 0.6335 MeV, annihilation photons of 0.511 MeV, and a physical half-life of 1.8 hours and 0.07% of an administered dose appears in breastmilk.[4]

Maternal Levels. A study in one mother who received an oral dose of 25 mg of nonradioactive sodium fluoride found that milk fluoride concentrations closely paralleled maternal serum fluoride concentration at 21 to 32% of maternal serum levels over an 8-hour period. The authors estimated that this represents only 0.2% of the dose given to the mother.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mountford P, Coakley A. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
2 Early P, Sodee D. Principles and practice of nuclear medicine. 2nd ed. St Louis Mosby-Year Book, Inc 1995:1380-1.
3 Stabin M, Breitz H. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
4 Leide-Svegborn S, Ahlgren L, Johansson L, et al. Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging 2016;43:808-21.26732471
5 Ekstrand J, Spak C-J, Falch J, et al. Distribution of fluoride to human breast milk following intake of high doses of fluoride. Caries Res 1984;18:93-5.6580962

## Substance Identification

### Substance Name

Sodium Fluoride F 18

### CAS Registry Number

22554-99-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Fluoride Radioisotopes

Diagnostic Agents